# Rasagiline

CASRN: 136236-51-6

## Drug Levels and Effects

### Summary of Use during Lactation

No clinical use of rasagiline during breastfeeding has been reported. Rasagiline might reduce serum prolactin and interfere with milk production. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Animal studies show that rasagiline reduces serum prolactin. The clinical relevance of these findings in nursing mothers is not known. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Selegiline

## Substance Identification

### Substance Name

Rasagiline

### CAS Registry Number

136236-51-6

### Drug Class

Breast Feeding

Lactation

Antiparkinson Agents

Monoamine Oxidase Inhibitors

Neuroprotective Agents